# Trimethobenzamide

CASRN: 138-56-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the continuous use of trimethobenzamide during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. Occasional, short-term use of trimethobenzamide for the treatment of nausea and vomiting appears to be acceptable.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Prochlorperazine

### References

1 Mahadevan U, Kane S. American Gastroenterological Association Institute Technical Review on the Use of Gastrointestinal Medications in Pregnancy. Gastroenterology 2006;131:283-311.16831611

## Substance Identification

### Substance Name

Trimethobenzamide

### CAS Registry Number

138-56-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Gastrointestinal Agents